# Teplizumab

CASRN: 876387-05-2

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of teplizumab during breastfeeding. Because teplizumab is a large protein molecule with a molecular weight of 150,000 Da, the amount in milk is likely to be very low.[1] It is also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal.[2] Waiting for at least 2 weeks postpartum to resume therapy may minimize transfer to the infant.[3] The manufacturer recommends that breastfeeding be discontinued during teplizumab therapy and for 20 days after the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Stratigakis A, Paty D, Zou P, et al. A regression approach for assessing large molecular drug concentration in breast milk. Reprod Breed 2023;3:199-207. doi:10.1016/j.repbre.2023.10.003
2 Anderson PO. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591-3.33956488
3 Krysko KM, Dobson R, Alroughani R, et al. Family planning considerations in people with multiple sclerosis. Lancet Neurol 2023;22:350-66.36931808

## Substance Identification

### Substance Name

### CAS Registry Number

876387-05-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies, Monoclonal, Humanized